# Propylthiouracil

CASRN: 51-52-5

## Drug Levels and Effects

### Summary of Use during Lactation

Propylthiouracil (PTU) had been considered the antithyroid drug of choice during lactation;[1,2] however, findings that the rates of liver injury higher with PTU than with methimazole has altered this judgement. Some experts now recommend that methimazole should be considered the antithyroid drug of choice in nursing mothers.[3-5] No cases of PTU-induced liver damage have been reported in breastfed infants, and it is unknown if the small amounts of the drug in breastmilk can cause liver damage. The drug or breastfeeding should be discontinued if liver toxicity is suspected. Dosages of PTU should be limited to 750 mg, but preferably 450 mg, daily during breastfeeding.[6]

### Drug Levels

Maternal Levels. A woman (time postpartum not stated) given a single dose of 100 mg of propylthiouracil (PTU) excreted a total of 0.077% of the dose in her breastmilk in 24 hours.[7]

After a single oral dose of 400 mg of propylthiouracil (PTU) in 9 women who were 1 to 9 months postpartum, peak milk levels averaging 0.7 mg/L were reached 1.5 hours after the dose. The authors estimated that the infant of a mother taking 200 mg 3 times a day would receive no more than 462 mcg daily or a maximum of 0.025% (range 0.07 to 0.077%) of the maternal dosage.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother was taking oral propylthiouracil 100 mg daily during pregnancy and 125 mg daily after delivery. In her infant, serum thyroxine (T4) concentration dropped slightly below the lower limit of normal on day 4 of life, but both T4 and thyrotropin (TSH) concentrations were normal on day 19 with continued maternal PTU therapy.[9] The drop in T4 was possibly due to propylthiouracil in breastmilk, but more likely from PTU received transplacentally.

An infant whose mother was taking propylthiouracil 200 to 300 mg daily was followed for 5 months and found to have normal thyroid function tests.[8]

A mother took PTU in a starting dose of 100 mg 3 times daily that was tapered to 50 mg twice daily over a period of 6 months. Her breastfed infant had normal thyroid function tests during this period at the ages of 9 to 13 months of age.[10]

Eight mothers taking PTU during pregnancy and doses of 50 to 300 mg daily after delivery exclusively or nearly exclusively breastfed their infants. The infants all had slightly low free T4 levels at birth and TSH levels were above normal in 7 of the 8, indicating that they had been affected by PTU in utero. All of their infants had normal free T4 and TSH levels when measured between 18 days and 8 months of age and none had any adverse effects reported from PTU in milk.[11]

The mothers of 11 fully breastfed infants were taking 300 to 750 mg daily of PTU starting at various times between delivery and 11 months postpartum. One infant had slightly elevated TSH level at 19 weeks of age when his mother was taking PTU 450 mg daily. Two other infants had elevated TSH levels at birth. TSH normalized in both infants with maternal PTU doses of 600 mg daily in one and a dose starting at 300 mg daily at term and increasing to 600 mg daily in the other.[12]

Two other infants were reported to be hypothyroid at birth, but to have normal thyroid function at 1 month of age despite maternal PTU therapy during breastfeeding.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Cooper DS. Antithyroid drugs: To breast-feed or not to breast-feed. Am J Obstet Gynecol 1987;157:234–5.2441601
2 Mandel SJ, Cooper DS. The use of antithyroid drugs in pregnancy and lactation. J Clin Endocrinol Metab 2001;86:2354–9.11397822
3 Karras S, Tzotzas T, Krassas GE. Antithyroid drugs used in the treatment of hyperthyroidism during breast feeding. An update and new perspectives. Hormones (Athens) 2009;8:254–7.20058397
4 Hudzik B, Zubelewicz-Szkodzinska B. Anti-thyroid drugs during breastfeeding. Clin Endocrinol (Oxf) 2016;85:827–30.27561657
5 Amino N, Arata N. Thyroid dysfunction following pregnancy and implications for breastfeeding. Best Pract Res Clin Endocrinol Metab 2020;34:101438.32651061
6 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
7 Low LC, Lang J, Alexander WD. Excretion of carbimazole and propylthiouracil in breast milk. Lancet 1979;314:1011.91730
8 Kampmann JP, Johansen K, Hansen JM, et al. Propylthiouracil in human milk: Revision of a dogma. Lancet 1980;1 (8171):736–7.6103158
9 Lamberg BA, Ikonen E, Osterlund K, et al. Antithyroid treatment of maternal hyperthroidism during lactation. Clin Endocrinol (Oxf) 1984;21:81–7.6744638
10 McDougall IR, Bayer MF. Should a woman taking propylthiouracil breast-feed? Clin Nucl Med 1986;11:249–50.3754191
11 Momotani N, Yamashita R, Yoshimoto M, et al. Recovery from foetal hypothyroidism: Evidence for the safety of breast-feeding while taking propylthiouracil. Clin Endocrinol (Oxf) 1989;31:591–5.2627753
12 Momotani N, Yamashita R, Makino F, et al. Thyroid function in wholly breast-feeding infants whose mothers take high doses of propylthiouracil. Clin Endocrinol (Oxf) 2000;53:177–81.10931098
13 Lee A, Moretti ME, Collantes A, et al. Choice of breastfeeding and physicians' advice: A cohort study of women receiving propylthiouracil. Pediatrics 2000;106:27–30.10878145

## Substance Identification

### Substance Name

Propylthiouracil

### CAS Registry Number

51-52-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antithyroid Agents

Thionamides